# Spinosad

CASRN: 168316-95-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of spinosad during breastfeeding. Because it is not systemically absorbed after topical application, it should not be present in breastmilk. However, the topical suspension contains benzyl alcohol, which may be systemically absorbed through the skin. High doses of benzyl alcohol are potentially toxic to neonates, but it is unlikely that doses this high reach breastmilk.[1] Any product applied to the breast should be removed from the breast with soap and water before breastfeeding to avoid direct infant exposure.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Permethrin, Pyrethrins

### References

1 Fernando DD, Fischer K. Spinosad topical suspension (0.9%): A new topical treatment for scabies. Expert Rev Anti Infect Ther 2022;20:1149-54.35799317

## Substance Identification

### Substance Name

Spinosad

### CAS Registry Number

168316-95-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Insecticides